# Dopamine

CASRN: 51-61-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of dopamine during breastfeeding. Because of its poor oral bioavailability and short half-life, any dopamine in milk is unlikely to affect the infant. Dopamine reduces serum prolactin in nonnursing women, but no information is available on its effect on milk production in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Intravenous dopamine infusion in doses of 2 to 5 mcg/kg/minute given to nonnursing subjects and in women with hyperprolactinemia decreases serum prolactin concentrations.[1-5] However, relevant published information on the effect of intravenous dopamine on milk production in nursing mothers was not found as of the revision date. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Crosignani PG, Reschini E, Peracchi M, et al. Failure of dopamine infusion to suppress the plasma prolactin response to sulpiride in normal and hyperprolactinemic subjects. J Clin Endocrinol Metab 1977;45:841-4.410826
2 Judd SJ, Rigg LA, Yen SS. The effects of ovariectomy and estrogen treatment on the dopamine inhibition of gonadotropin and prolactin release. J Clin Endocrinol Metab 1979;49:182-4.572372
3 Leblanc H, Lachelin GC, Abu-Fadil S, et al. Effects of dopamine infusion on pituitary hormone secretion in humans. J Clin Endocrinol Metab 1976;43:668-74.956350
4 Massara F, Camanni F, Vergano V, et al. Inhibition of thyrotropin and prolactin secretion by dopamine in man. J Endocrinol Invest 1978;1:25-30.573767
5 Nicoletti I, Filipponi P, Sfrappini M, et al. Catecholamines and pituitary function. I. Effects of catecholamine synthesis inhibition and subsequent catecholamine infusion on gonadotropin and prolactin serum levels in normal cycling women and in women with hyperprolactinemic amenorrhea. Horm Res 1984;19:158-70.6425187

## Substance Identification

### Substance Name

Dopamine

### CAS Registry Number

51-61-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cardiotonic Agents

Catecholamines

Dopamine Agents

Sympathomimetics